# Lumasiran

CASRN: 1834610-13-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of lumasiran during breastfeeding. Because lumasiran is 85% bound to plasma proteins and has a molecular weight of about 17,000 Da, the amount in milk is likely to be low. In addition, because lumasiran is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. The drug is approved for use in children weighing less than 10 kg. If the mother requires lumasiran, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Lumasiran

### CAS Registry Number

1834610-13-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

RNA, Small Interfering